# Enalapril

CASRN: 75847-73-3

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the very low levels of enalapril in breastmilk, amounts ingested by the infant are small and have not been detected in infant serum or caused any adverse effects in a few breastfed infants. If a mother requires enalapril, it is not a reason to discontinue breastfeeding.

### Drug Levels

Enalapril is an inactive drug that is metabolized to the active metabolite enalaprilat. Enalaprilat is poorly absorbed orally.

Maternal Levels. One mother taking a single oral dose of enalapril 5 mg and 2 mothers taking a single dose 10 mg 3 to 45 days postpartum had undetectable enalaprilat milk levels (<0.2 mcg/L) 4 hours after a single dose; enalapril levels were not determined. The angiotensin converting enzyme activity in milk of all women was within the normal range and unchanged after the dose compared to the predose values.[1]

A woman who had been taking oral enalapril 10 mg daily for 11 months had peak enalapril milk levels of 2 mcg/L 4 hours after a dose and peak enalaprilat levels of 0.75 mcg/L about 9 hours after the dose.[2]

Enalapril and enalaprilat milk levels were determined in 5 women who were in the immediate postpartum period and not breastfeeding. After a single 20 mg oral dose, the average peak enalapril milk level was 1.7 mcg/L (range 0.54 to 5.9 mcg/L) at 4 to 6 hours after the dose. Enalapril was not detectable (assay limit not specified) after 4 hours in 4 of the 5 women. The average peak enalaprilat level was 1.7 mcg/L (range 1.2 to 2.3 mcg/L); peaks occurred at various times over the 24-hour period. The authors estimated that a breastfed infant would receive less than 2 mcg daily of enalaprilat.[3] Using the peak milk level data, the estimated maximum intake of an exclusively breastfed infant would be about 0.16% of the maternal weight-adjusted dosage, half as enalaprilat.

A mother started taking enalapril 5 mg daily for IgA nephropathy at 11 weeks postpartum while exclusively breastfeeding. On day 101 postpartum, 25 days after therapy started, 6 milk samples were collected over the 24 hours after the dose. The estimated RID of enalapril plus enalaprilat was 0.196%.[4]

Infant Levels. A mother started taking enalapril 5 mg daily for IgA nephropathy at 11 weeks postpartum while exclusively breastfeeding. On day 101 postpartum, 25 days after therapy started, one infant blood sample was collected. Infant enalapril and enalaprilat plasma concentrations were below the lower limit of quantification (<0.2 mcg/L).[4]

### Effects in Breastfed Infants

None reported in 5 breastfed infants whose mothers were taking oral enalapril 5 to 10 mg daily.[1,2,4]

### Effects on Lactation and Breastmilk

In 15 postmenopausal hypertensive women (prior lactation status not stated), serum prolactin levels were decreased by 22% compared to placebo after enalapril 20 mg once daily for 15 days.[5] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A woman with pre-eclampsia was treated was started at term with oral enalapril 10 mg daily. Her milk came in on day 3 postpartum and she had no difficulties with nursing during 5 weeks of observation.[6]

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Lisinopril, Quinapril, Valsartan

### References

1 Huttunen K, Gronhagen-Riska C, Fyhrquist F. Enalapril treatment of a nursing mother with slightly impaired renal function. Clin Nephrol 1989;31:278.2544326
2 Rush JE, Snyder DL, Barrish A, et al. Comment on Huttunen K, Gronhagen-Riska C and Fyrquist F, 1989 Enalapril treatment of a nursing mother with slightly impaired renal function. Clin Nephrol 1991;35:234.1649713
3 Redman CW, Kelly JG, Cooper WD. The excretion of enalapril and enalaprilat in human breast milk. Eur J Clin Pharmacol 1990;38:99.2158450
4 Jacobs E, Ceulemans M, Nauwelaerts N, et al. Very low enalapril and enalaprilat exposure via human milk: A case report from the ConcePTION project. Front Pharmacol 2025;16:1727499.41640682
5 Lombardi C, Missale C, De Cotiis R, et al. Enalapril decreases plasma prolactin levels in hypertensive patients. J Biol Regul Homeost Agents 1989;3:128–30.2560316
6 Bach N. Enalapril treatment of a pre-eclamptic woman. Ugeskr Laeger 1995;157:1203–4.7701668

## Substance Identification

### Substance Name

Enalapril

### CAS Registry Number

75847-73-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin-Converting Enzyme Inhibitors

ACE Inhibitors

ACEIs